# Senna

CASRN: 8013-11-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although an early uncontrolled report using an old senna product found increased frequency of diarrhea in breastfed infants, several controlled studies using modern senna products found no effect on the infant. Usual doses of senna are acceptable to use during breastfeeding.

### Drug Levels

Maternal Levels. After administration of 3.6 mL of senna fluidextract on day 5 postpartum, senna was undetectable (<2.8 g/L) in the breastmilk of 10 women.[1]

Twenty five nursing mothers averaging 4.7 months postpartum (range 2.5 to 15 months) were given a single 100 mg of a senna tablet containing 8.6 mg of sennosides a and b (Senokot). Milk was expressed every 30 minutes for 6 hours. Sennosides a and b were undetectable (<0.34 mg/L) in all samples of breastmilk. Three mothers whose infants reportedly had loose stools were subsequently given a double dose of the tablets, but sennosides a and b remained undetectable.[2]

Twenty postpartum mothers were given a laxative containing plantango seeds (psyllium) and senna equivalent to 15 mg of sennosides a and b daily on days 2 to 4 postpartum. A median of 5 samples of breastmilk were taken during the 26 hours after the last dose. Rhein, a metabolite of the sennosides, was measured in milk. Peak rhein milk levels generally occurred 10 hours after the dose. The authors estimated that all breastfed infants would have received at most 500 ng/kg of rhein.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

After administration of 3.6 mL of senna fluidextract on day 5 postpartum, a laxative effect on the bowels was observed in 6 of 10 infants.[1]

In another observational study, no cases of diarrhea were observed among the breastfed infants of 148 mothers who received 2 teaspoonfuls of Senokot (equivalent to 700 mg of senna pod) on day 3 postpartum.[4]

Fifty mothers who were in the first day postpartum received senna equal to 450 mg of senna pod. Additional doses were given on subsequent days if needed. None of their breastfed infants were noted to have any markedly abnormal stools, although all of the infants also received supplemental feedings.[5]

In a randomized, nonblinded study, 35 mothers were given tablets containing a total of 14 mg of standardized senna extract once daily for 2 weeks starting in the immediate postpartum period. Six of the 37 breastfed infants were reported to have diarrhea which was a higher percentage than with other nonabsorbable laxatives in the study.[6]

Sixteen women were given 800 mg of powdered senna containing 24 mg of sennosides. None of their breastfed infants had any abnormal stools.[7]

A randomized, double-blind trial compared commercial senna tablets (Senokot) in a dose of 2 tablets (14 mg sennosides a and b) twice daily for 8 doses started on the first day postpartum to placebo. Of the women in the study, 126 breastfed their infants and took senna while 155 control mothers breastfed their infants. There was no difference in the percentages of infants in the active and control groups with loose stools or diarrhea.[8]

Twenty postpartum mothers were given a laxative containing plantango seeds (psyllium) and senna equivalent to 15 mg of sennosides a and b daily on days 2 to 4 postpartum. Of the 11 infants who were breastfed, none had any loose stools.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Bisacodyl, Docusate, Magnesium Hydroxide, Psyllium

### References

1 Tyson RM, Shrader EA, Perlman HH. Drugs transmitted through breast milk. Part I: Laxatives. J Pediatr 1937;11:824-32. doi:10.1016/S0022-3476(37)80040-2
2 Werthmann MW, Jr, Krees SV. Quantitative excretion of Senokot in human breast milk. Med Ann Dist Columbia 1973;42:4-5.4511106
3 Faber P, Strenge-Hesse A. Relevance of rhein excretion into breast milk. Pharmacology 1988;36 (Suppl 1):212-20.3368521
4 Duncan AS. Standardized senna as a laxative in the puerperium. A clinical assessment. Br Med J 1957;1:439-41.13396280
5 Baldwin WF. Clinical study of senna administration to nursing mothers: Assessment of effects on infant bowel habits. Can Med Assoc J 1963;89:566-8.14045350
6 Greenhalf JO, Leonard HS. Laxatives in the treatment of constipation in pregnant and breast-feeding mothers. Practitioner 1973;210:259-63.4570522
7 Dubecq JP, Palmade J. Clinical study on the administration of Tamarine in the nursing mother. Gaz Med Fr 1974;81:5173-5.
8 Shelton MG. Standardized senna in the management of constipation in the puerperium. A clinical trial. S Afr Med J 1980;57:78-80.6996138

## Substance Identification

### Substance Name

Senna

### CAS Registry Number

8013-11-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cathartics

Gastrointestinal Agents